# Iodohippurate Sodium I 125

CASRN: 7230-65-1

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of iodohippurate sodium I 125 (ortho-iodohippurate sodium I 125; I 125 OIH) as a kidney function diagnostic agent. International experts recommend nursing the infant just before administration of the radiopharmaceutical and interrupting breastfeeding for 12 to 18 hours after the dose.[1-3] If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[1,4,5]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[6]

### Drug Levels

I 125 is a low-energy pure gamma emitter with a physical half-life of 59.4 days.[2] The effective half-life of I 125 OIH averages 4.8 to 5 hours.[3,6,7] About 2% of an administered dose is excreted into breastmilk.[3]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Iothalamate Sodium I 125

### References

1 Mountford PJ, Coakley AJ. (1989). A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun.
2 Mattsson S, Johansson L, Leide Svegborn S, et al. (2015). Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP.
3 Leide-Svegborn S, Ahlgren L, Johansson L, et al. (2016). Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging.
4 Early PJ, Sodee DB. Principles and practice of nuclear medicine. 2nd ed. St Louis Mosby-Year Book, Inc 1995:1380-1.
5 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
6 Stabin MG, Breitz HB. (2000). Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med.
7 Mountford PJ, Coakley AJ. (1989). Secretion of radioactivity in breast milk following administration of 123I hippuran. Br J Radiol.

## Substance Identification

### Substance Name

Iodohippurate Sodium I 125

### CAS Registry Number

7230-65-1

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Iodine Radioisotopes

Diagnostic Agents